# Neostigmine

CASRN: 59-99-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that use of neostigmine to treat myasthenia gravis may be acceptable during breastfeeding, although pyridostigmine may be preferred. Monitor newborns because abdominal cramps after each breastfeeding has been reported. Because of its short half-life, single doses of neostigmine to reverse neuromuscular blockade following surgery are unlikely to adversely affect the breastfed infant more than transiently.

### Drug Levels

Maternal Levels. In a case series of 12 patients with 21 pregnancies in the 1950s and 1960s, the authors could not detect neostigmine in the breastmilk of several of the mothers. However, details of the dosage, timing and assay sensitivity were not stated.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Six infants of mothers treated with neostigmine for myasthenia gravis were reportedly breastfed successfully. One newborn infant appeared to have abdominal cramps after each breastfeeding, probably caused by neostigmine, although it could not be detected in the breastmilk of the infant's mother.[1]

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. In animals, cholinergic drugs increase oxytocin release,[2] and have variable effects on serum prolactin.[3] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A study compared neostigmine to sugammadex in their effects on lactation-related hormones in women undergoing cesarean section surgery under general anesthesia. Both groups showed significant decreases in progesterone and estradiol levels after surgery compared to preoperative values; however, the sugammadex group exhibited a significantly greater decrease. Aldosterone levels reached their highest point at the end of surgery, but by 4 hours later they were lower than before surgery, especially in the sugammadex group. Cortisol showed a temporary postoperative elevation, whereas prolactin and oxytocin levels rose in both groups, with no significant intergroup variations.[4]

### Alternate Drugs to Consider

Pyridostigmine

### References

1 Fraser D, Turner JW. Myasthenia gravis and pregnancy. Proc R Soc Med 1963;56:379–81.19994245
2 Clarke G, Fall CH, Lincoln DW, et al. Effects of cholinoceptor antagonists on the suckling-induced and experimentally evoked release of oxytocin. Br J Pharmacol 1978;63:519–27.566601
3 Müller EE, Locatelli V, Cella S, et al. Prolactin-lowering and -releasing drugs: Mechanisms of action and therapeutic applications. Drugs 1983;25:399–432.6133737
4 Akça Ş, Karayol Akın A, Özdemir F, et al. Effects of sugammadex and neostigmine on maternal steroid and lactation-related hormone levels during cesarean section: A randomized clinical trial. J Clin Pract Res 2025;47:615–21. doi:10.14744/cpr.2025.59421

## Substance Identification

### Substance Name

Neostigmine

### CAS Registry Number

59-99-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cholinesterase Inhibitors

Parasympathomimetics